# Broccoli

## Drug Levels and Effects

### Summary of Use during Lactation

Broccoli (Brassica oleracea var. italica) has no specific use during breastfeeding. Broccoli contains sulforaphane, which is a bioactive phytonutrient found in cruciferous vegetables that is detectable in breastmilk. Some low-quality evidence indicates that maternal cabbage ingestion might cause colic in their breastfed infants.[1] Many women believe that infant crying and fussiness is related to abdominal pain linked to feeding, and had eliminated items, such as broccoli, from their diet in an attempt to change infant behavior, although there is no good evidence to support this assumption.[2] Moderately good evidence supports that maternal intake of vegetables during early breastfeeding will improve their infant’s liking of those vegetables later in life.[3-6]

### Drug Levels

Maternal Levels. A pilot study detected no sulforaphane, but did detect its metabolite, sulforaphane-N-acetylcysteine, in the milk of 7 of 8 mothers who had recently eaten a cruciferous vegetable, such as broccoli. The eighth mother reported low intake of cruciferous vegetables in the prior 24 hours.[7]

A single oral dose of a broccoli sprout extract (EnduraCell) equivalent to 21 mg of sulforaphane, was administered to 8 women prior to cesarean section. Two to four days post-delivery, a second dose was administered. Two hours later, maternal blood and breastmilk were collected. Sulforaphane was detected in breastmilk in an average concentration of 1.33 mcg/L.[8]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Maternal broccoli intake was studied as a possible cause of colic in breastfed infants. A questionnaire was sent to nursing mothers asking about food intake during the previous week and their infants' symptoms of colic during that time. One hundred seventy-one mothers who reported colic in their infants during the prior week were 30% more likely to have eaten broccoli during this time than mothers of infants who did not have colic during the previous week. Additionally, many other mothers reported avoiding cruciferous vegetables (e.g., broccoli, cabbage, cauliflower) because of previous symptoms of colic in their breastfed infants that they attributed to these foods.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Lust KD, Brown JE, Thomas W. Maternal intake of cruciferous vegetables and other foods and colic symptoms in exclusively breast-fed infants. J Am Diet Assoc 1996;96:46–8.8537569
2 Kidd M, Hnatiuk M, Barber J, et al. "Something is wrong with your milk": Qualitative study of maternal dietary restriction and beliefs about infant colic. Can Fam Physician 2019;65:204–11.30867180
3 Mennella JA. Mother's milk: A medium for early flavor experiences. J Hum Lact 1995;11:39–45.7748264
4 Mennella JA. Ontogeny of taste preferences: Basic biology and implications for health. Am J Clin Nutr 2014;99:704S–11S.24452237
5 Mennella JA, Daniels LM, Reiter AR. Learning to like vegetables during breastfeeding: A randomized clinical trial of lactating mothers and infants. Am J Clin Nutr 2017;106:67–76.28515063
6 Spahn JM, Callahan EH, Spill MK, et al. Influence of maternal diet on flavor transfer to amniotic fluid and breast milk and children's responses: A systematic review. Am J Clin Nutr 2019;109 (Suppl 7):1003s–26s.30982867
7 Shore R, Behlen J, McBee D, et al. Lactational transfer of sulforaphane-N-acetylcysteine in vivo and in human breast milk. Toxicol Appl Pharmacol 2024;482:116796.38145809
8 Whalen EF, Fields NJ, Palmer KR, et al. Assessing the transplacental passage and breastmilk levels of broccoli sprout-derived sulforaphane. Placenta 2025;171:62–70.40992247

## Substance Identification

### Substance Name

Broccoli

### Scientific Name

Brassica oleracea var. italica

### Drug Class

Breast Feeding

Lactation

Milk, Human

Food